# Promethazine

CASRN: 60-87-7

## Drug Levels and Effects

### Summary of Use during Lactation

Based on minimal excretion of other phenothiazine derivatives, it appears that occasional short-term use of promethazine for the treatment of nausea and vomiting poses little risk to the breastfed infant. With repeated doses, observe infants for excess sedation. Because promethazine can lower basal prolactin secretion, promethazine might interfere with the establishment of lactation if given during labor before lactation is well established or with a sympathomimetic such as pseudoephedrine. An antiemetic without potent histamine blocking action is preferred in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Unlike most phenothiazines, promethazine usually causes a reduction in basal prolactin secretion in nonnursing women.[1,2] In one small study, women given promethazine with meperidine and secobarbital during labor, had the time to lactogenesis II prolonged by 14 hours. Women given meperidine or secobarbital without promethazine had lactogenesis II prolonged 7 hours compared to unmedicated women, but the difference was not statistically significant.[3] The effect of postpartum promethazine is not known, but it might interfere with the establishment of lactation if given in the early postpartum period.

### Alternate Drugs to Consider

Prochlorperazine

### References

1 Messinis IE, Souvatzoglou A, Fais N, et al. Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest 1985;8:143-6.3928731
2 Pontiroli AE, De Castro e Silva E, Mazzoleni F, et al. The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab 1981;52:924-8.7228996
3 Hildebrandt HM. Maternal perception of lactogenesis time: A clinical report. J Hum Lact 1999;15:317-23.10776182

## Substance Identification

### Substance Name

Promethazine

### CAS Registry Number

60-87-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Antipruritics

Phenothiazines